# Bilastine

CASRN: 202189-78-4

## Drug Levels and Effects

### Summary of Use during Lactation

Because no information is available on the use of bilastine during breastfeeding, an alternate drug may be preferred, especially while nursing a newborn or preterm infant. If it is used in a nursing mother, monitor the infant for sedation, poor feeding and poor weight gain.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Cetirizine, Desloratadine, Fexofenadine, Levocetirizine, Loratadine

## Substance Identification

### Substance Name

Bilastine

### CAS Registry Number

202189-78-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihistamines

Nonsedating Antihistamines

Histamine Antagonists